# Deferiprone

CASRN: 30652-11-0

## Drug Levels and Effects

### Summary of Use during Lactation

Deferiprone is likely actively transported into milk through binding with lactoferrin.[1] Because no information is available on the use of deferiprone during breastfeeding and it is orally absorbed, an alternate drug is preferred, especially while nursing a newborn or preterm infant. Australian guidelines recommend against breastfeeding during deferiprone treatment.[2] The US manufacturer recommends withholding breastfeeding for 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Deferoxamine, Deferasirox

### References

1 Asmari M, Waqas M, Ibrahim AE, et al. (2022). Microscale thermophoresis and molecular modelling to explore the chelating drug transportation in the milk to infant. Molecules.
2 Ho PJ, Tay L, Lindeman R, et al. (2011). Australian guidelines for the assessment of iron overload and iron chelation in transfusion-dependent thalassaemia major, sickle cell disease and other congenital anaemias. Intern Med J.

## Substance Identification

### Substance Name

Deferiprone

### CAS Registry Number

30652-11-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Chelating Agents

Iron Chelating Agents